# Phenazopyridine

CASRN: 94-78-0

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

The safety of phenazopyridine is not established in infants or during breastfeeding. Because it can cause methemoglobinemia, sulfhemoglobinemia, and hemolytic anemia, it should be avoided while breastfeeding, especially with an infant under 1 month of age or with glucose-6-phosphate dehydrogenase (G6PD) deficiency.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Phenazopyridine

### CAS Registry Number

94-78-0

### Drug Class

- Breast Feeding
- Lactation
- Anesthetics, Urinary